# Indocyanine Green

CASRN: 3599-32-4

## Drug Levels and Effects

### Summary of Use during Lactation

Data from one patient indicates that a low subcutaneous dose of indocyanine green is not detectable in breastmilk. The manufacturer reports 17 cases of indocyanine green use in lactating women with no reported adverse effects in infants. Indocyanine green appears to be acceptable during breastfeeding, but it should be used with caution, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. A nursing mother with lower limb lymphedema was given indocyanine green intradermally for lymphangiography. Although the dosage was not stated, the article referred to other papers that used 0.2 mL of a 0.25% solution of indocyanine green injected subcutaneously into both lower extremities, with detection by fluorescent imaging of lymphatic drainage channels using an infrared camera. The mother expressed milk approximately after imaging was complete at about 3 hours after the dose. Observation of the milk was performed with an infrared camera, which revealed no fluorescent enhancement of the milk.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

The manufacturer reports 17 cases of indocyanine green use in lactating women with no adverse events observed in the breastfed infant.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Sakai H, Tsukuura R, Kageyama T. Non-enhancement of the breast milk after subcutaneous indocyanine green injection: Is indocyanine green lymphography safe for breast-feeding patients? Microsurgery 2021;41:198-9.33398900

## Substance Identification

### Substance Name

Indocyanine Green

### CAS Registry Number

3599-32-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Coloring Agents

Diagnostic Agents